# Ponesimod

CASRN: 854107-55-4

## Drug Levels and Effects

### Summary of Use during Lactation

Although ponesimod is highly bound in maternal plasma and unlikely to reach the breastmilk in large amounts, it has a slow clearance and long half-life and is potentially toxic to the breastfed infant, it has a slow clearance and long half-life and is potentially toxic to the breastfed infant. Because there is no published experience with ponesimod during breastfeeding, expert opinion generally recommends that the closely related drug fingolimod should be avoided during breastfeeding, especially while nursing a newborn or preterm infant.[1-6] However, the manufacturer's labeling does not recommend against the use of ponesimod in breastfeeding.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Multiple Sclerosis) Glatiramer, Immune Globulin, Interferon Beta

### References

1 Bove R, Alwan S, Friedman JM, et al. Management of multiple sclerosis during pregnancy and the reproductive years: A systematic review. Obstet Gynecol 2014;124:1157-68.25415167
2 Cree BA. Update on reproductive safety of current and emerging disease-modifying therapies for multiple sclerosis. Mult Scler 2013;19:835-43.23319073
3 Houtchens MK, Kolb CM. Multiple sclerosis and pregnancy: Therapeutic considerations. J Neurol 2013;260:1202-14.22926165
4 Almas S, Vance J, Baker T, et al. Management of multiple sclerosis in the breastfeeding mother. Mult Scler Int 2016;2016:6527458.26966579
5 Kaplan TB. Management of demyelinating disorders in pregnancy. Neurol Clin 2019;37:17-30.30470273
6 Dobson R, Dassan P, Roberts M, et al. UK consensus on pregnancy in multiple sclerosis: 'Association of British Neurologists' guidelines. Pract Neurol 2019;19:106-14.30612100

## Substance Identification

### Substance Name

Ponesimod

### CAS Registry Number

854107-55-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Immunosuppressive Agents

Sphingosine 1 Phosphate Receptor Modulators